# Isocarboxazid

CASRN: 59-63-2

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the lack of data on use during breastfeeding, other antidepressants are preferred during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

## Substance Identification

### Substance Name

Isocarboxazid

### CAS Registry Number

59-63-2

### Drug Class

- Breast Feeding
- Lactation
- Antidepressive Agents
- Monoamine Oxidase Inhibitors